# Betamethasone

CASRN: 378-44-9

## Drug Levels and Effects

### Summary of Use during Lactation

Betamethasone has not been well studied during breastfeeding. Systemic betamethasone is best avoided in favor of one of the shorter-acting and better studied alternatives because of its potency and low protein binding, which favors its passage into milk. Use of betamethasone 3 to 9 days prior to delivery of a preterm infant might decrease postpartum milk production in some women. Local injections, such as for tendinitis, would not be expected to cause any adverse effects in breastfed infants,[1] but might occasionally cause temporary loss of milk supply. See also Betamethasone, Topical.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

None reported with any corticosteroid.

### Effects on Lactation and Breastmilk

A 5.7 mg dose of depot betamethasone injected into the shoulder for bursitis had no effect in the milk supply in one mother.[2] However, medium to large doses of depot corticosteroids injected into joints have been reported to cause temporary reduction of lactation.[2,3]

A double-blind study in the 1970s randomized pregnant women in preterm labor to either 6 mg of short-acting betamethasone phosphate plus 6 mg long-acting betamethasone acetate or a control treatment containing 6 mg cortisone acetate. Later in the trial, the doses were doubled because of an incomplete response. A total of 560 women received betamethasone and 582 received cortisone. No difference was seen in the percentage of women lactating at hospital discharge (32% and 30.5%, respectively); however, these percentages are very low compared to the rates in many hospitals today.[4]

A study of 46 women who delivered an infant before 34 weeks of gestation found that a course of betamethasone (2 intramuscular injections of 11.4 mg of betamethasone 24 hours apart) given between 3 and 9 days before delivery resulted in delayed lactogenesis II and lower average milk volumes during the 10 days after delivery. Milk volume was not affected if the infant was delivered less than 3 days or more than 10 days after the mother received the corticosteroid.[5]

A study of 87 pregnant women found that betamethasone given as above during pregnancy caused a premature stimulation of lactose secretion during pregnancy. Although the increase was statistically significant, the clinical importance appears to be minimal.[6]

### Alternate Drugs to Consider

(Systemic) Methylprednisolone, Prednisolone, Prednisone

### References

1 Schned ES. DeQuervain tenosynovitis in pregnant and postpartum women. Obstet Gynecol 1986;68:411-4.3488531
2 McGuire E. Sudden loss of milk supply following high-dose triamcinolone (Kenacort) injection. Breastfeed Rev 2012;20:32-4.22724311
3 Babwah TJ, Nunes P, Maharaj RG. An unexpected temporary suppression of lactation after a local corticosteroid injection for tenosynovitis. Eur J Gen Pract 2013;19:248-50.24261425
4 Walters AGB, Lin L, Crowther CA, et al. Betamethasone for preterm birth: Auckland Steroid Trial full results and new insights 50 years on. J Pediatr 2022;255:80-8.36336005
5 Henderson JJ, Hartmann PE, Newnham JP, et al. Effect of preterm birth and antenatal corticosteroid treatment on lactogenesis II in women. Pediatrics 2008;121:e92-100.18166549
6 Henderson JJ, Newnham JP, Simmer K, et al. Effects of antenatal corticosteroids on urinary markers of the initiation of lactation in pregnant women. Breastfeed Med 2009;4:201-6.19772378

## Substance Identification

### Substance Name

Betamethasone

### CAS Registry Number

378-44-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Corticosteroids, Systemic

Glucocorticoids

Anti-Inflammatory Agents